# Dialysis

## Drug Levels and Effects

### Summary of Use during Lactation

There are reported cases of breastfeeding during dialysis. Analysis of breastmilk indicates that the milk concentrations of some solutes are abnormal. Authors who managed one patient suggest that breastfeeding after hemodialysis might be preferable to breastfeeding before hemodialysis and milk pumped just before dialysis should be discarded.[1] Another group discouraged breastfeeding by dialysis patients because of the abnormal content of breastmilk.[2] However, others have advocated for continued breastfeeding during dialysis.[3,4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Hyperprolactinemia is a well-known complication of chronic kidney disease.[5-7] Hyperprolactinemia can cause effects such as galactorrhea and hypertension. Dopaminergic agonists such as bromocriptine and cabergoline have been used to counteract these effects.[8,9] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A mother with end-stage renal disease receiving hemodialysis 3 times weekly partially breastfed her infant for 10 weeks postpartum. Breastmilk samples were collected at various times between day 10 and week 10 postpartum. Sodium and chloride concentrations in breastmilk were higher than in 6 control women without kidney disease, but sodium, chloride, potassium and magnesium in breastmilk were similar pre- and post-dialysis. Phosphate concentration in breastmilk was lower than normal, and the mother partially fed her infant with a high-phosphate formula to compensate. Urea, creatinine, and uric acid were higher in breastmilk than in controls, but all were reduced by dialysis; urea levels in breastmilk were normal in post-dialysis samples. Although glucose levels in breastmilk were lower in the patient's milk than in control milk, it was not different pre- and post-dialysis. Protein, triglycerides, cholesterol and immunoglobulins were similar to control milk and were not affected by dialysis. The authors suggest that breastfeeding after a dialysis session is preferable to breastfeeding prior to a dialysis session. They instructed the mother to discard milk pumped immediately prior to dialysis.[1]

A woman who was on chronic hemodialysis of 20 to 24 hours per week plus renal replacement therapy delivered a healthy infant and breastfed her infant for 1 month. Several breastmilk components were measured 5 times on a dialysis day and compared to those in the milk of 5 normal control patients. Creatinine was always higher in the milk of the patient than the controls. The lowest levels of creatinine and urea in milk occurred 4 hours after dialysis. Total protein and albumin were lower than those of the control patients, with the lowest protein level immediately after dialysis. Albumin was affected less, but reached its lowest level at 4 hours after dialysis. Secretory IgA, IgA, IgM and 8 proinflammatory cytokines were not markedly different from the controls, but the anti-inflammatory cytokines IL-4 and IL-10 were lower in the patient’s milk than in control milk after dialysis with the nadir at 7 hours after dialysis.[2]

### References

1 Balzer MS, Gross MM, Lichtinghagen R, et al. Got milk? Breastfeeding and milk analysis of a mother on chronic hemodialysis. PLoS One 2015;10:e0143340.26571490
2 Kondakova EV, Filat'eva AE, Lobanova NA, et al. Case report: Applicability of breastfeeding the child of a patient with kidney failure with replacement therapy. Front Med (Lausanne) 2023;10:1098324.36844211
3 Orozco A, Piccoli G. Breastfeeding in the dialysis ward. Kidney Int Rep 2025;10:616–7.39990890
4 Bajpai D, Mangalgi S, Verma P, et al. Pregnancy in women on home dialysis: Your questions answered. Perit Dial Int 2025;46:202–12.41148202
5 Cowden EA, Ratcliffe WA, Ratcliffe JG, et al. Hyperprolactinaemia in renal disease. Clin Endocrinol (Oxf) 1978;9:241–8.709894
6 Lim VS, Ferrari E. Hyperprolactinemia in chronic renal failure. Int J Artif Organs 1981;4:152–3.7327755
7 Carrero JJ, Kyriazis J, Sonmez A, et al. Prolactin levels, endothelial dysfunction, and the risk of cardiovascular events and mortality in patients with CKD. Clin J Am Soc Nephrol 2012;7:207–15.22193237
8 Gulleroglu K, Olgac A, Bayrakci U, et al. Hyperprolactinemia as a rare cause of hypertension in chronic renal failure. Ren Fail 2012;34:792–4.22462393
9 van Leusen R, Meinders AE. Successful treatment of galactorrhoea during chronic haemodialysis with bromocriptine: A case report. Neth J Med 1977;20:278–82.565011

## Substance Identification

### Substance Name

Dialysis

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hemodialysis, Home

Peritoneal Dialysis

Renal Dialysis